# Hollyhock

CASRN: 97926-66-4

## Drug Levels and Effects

### Summary of Use during Lactation

The constituents of hollyhock (Alcea rosea, Althaea rosea) leaf have not been well described, but it is believed to contain flavonoids, phenolic acids, and tannins. Few studies on hollyhock related to breastfeeding exist, but one moderately well done study found that a compress of hollyhock leaf sped resolution of engorgement during breastfeeding.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A nonblinded, randomized trial of hollyhock leaf compresses in addition to warm compresses followed by cold compresses was compared to the warm and cold compresses alone in the treatment of breast engorgement. Nursing mothers completed the procedures on their own and rated their own levels of engorgement based on a standard checklist. Twenty women in each group completed the study. Although both groups had a lessening of their engorgement scores over the 6-day study period, the mothers who used the hollyhock compresses had a more rapid decrease in engorgement.[1]

### References

1 Khosravan S, Mohammadzadeh-Moghadam H, Mohammadzadeh F, et al. (2017). The effect of hollyhock (Althaea officinalis L) leaf compresses combined with warm and cold compress on breast engorgement in lactating women: A randomized clinical trial. J Evid Based Complementary Altern Med.

## Substance Identification

### Substance Name

Hollyhock

### Scientific Name

Alcea rosea Althaea rosea Althaea ficifolia

### CAS Registry Number

97926-66-4

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal